# Tenapanor

CASRN: 1234423-95-0

## Drug Levels and Effects

### Summary of Use during Lactation

Tenapanor is virtually not absorbed systemically, with undetectable plasma concentrations following oral administration. Tenapanor and its major metabolite were not detected in the breastmilk of lactating women. No special precautions are necessary.

### Drug Levels

Maternal Levels. A clinical lactation study was conducted in seven healthy women. Following oral administration of tenapanor 50 mg twice daily for 3 days, milk samples were collected before a dose then at 1, 2, 4, 6, 8, and 24 hours after the dose. The concentrations of tenapanor and its major metabolite were undetectable (<1 mcg/L) in all milk samples collected over 24 hours after a dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Brenner DM, Raju K, Kozuka K, et al. Neither tenapanor nor its major metabolite were detected in the breast milk of healthy lactating females after 4 days of dosing: A phase 1, open-label, pharmacokinetic study. Gastroenterology 2025;169:S–499. doi:10.1016/S0016-5085(25)02085-2

## Substance Identification

### Substance Name

Tenapanor

### CAS Registry Number

1234423-95-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Sodium Hydrogen Exchanger 3 Inhibitor

NHE3 inhibitor